# Tauroselcholic Acid Se-75

CASRN: 75018-70-1

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of tauroselcholic acid Se-75 (SeHCAT; selenium-75 homocholic acid taurine) as a diagnostic agent. Information from one patient indicates that the effective radiation dose to the infant from SeHCAT excreted in breastmilk over 6 months is below any established dose limits and no special precautions are required.[1]

### Drug Levels

Selenium Se 75 decays by electron capture with a physical half-life of approximately 119 days.

Maternal Levels. A nursing mother who was 3 months postpartum was given a capsule containing 370 kBq of SeHCAT as a diagnostic test. She collected 3 milk samples daily for 7 days. The effective radiation dose to the infant was 7 microSv over the 7-day period and the radiation dose over a 6-month period of exclusive breastfeeding was estimated to be 17 microSv.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Coleclough S, Comber E, Adesanya O, Rowley L. Estimation of infant radiation exposure from ingestion of breastmilk after SeHCAT capsule administration. Nucl Med Commun 2023;44:1199-200. doi:10.1097/MNM.0000000000001789

## Substance Identification

### Substance Name

Tauroselcholic Acid Se-75

### CAS Registry Number

75018-70-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Selenium Radioisotopes

Diagnostic Agents